# Lomefloxacin

CASRN: 98079-51-7

## Drug Levels and Effects

### Summary of Use during Lactation

Lomefloxacin is no longer available on the US market. No information is available on the use of lomefloxacin during breastfeeding. Fluoroquinolones have traditionally not been used in infants because of concern about adverse effects on the infants' developing joints. However, recent studies indicate little risk.[1,2] The calcium in milk might prevent absorption of the small amounts of fluoroquinolones in milk,[3] but insufficient data exist to prove or disprove this assertion. Use of lomefloxacin is acceptable in nursing mothers with monitoring of the infant for possible effects on the gastrointestinal flora, such as diarrhea or candidiasis (thrush, diaper rash). However, it is preferable to use an alternate drug for which safety information is available.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin

### References

1 Gürpinar AN, Balkan E, Kiliç N, et al. The effects of a fluoroquinolone on the growth and development of infants. J Int Med Res 1997;25:302-6 9364293
2 van den Oever HL, Versteegh FG, Thewessen EA, et al. Ciprofloxacin in preterm neonates: Case report and review of the literature. Eur J Pediatr 1998;157:843-5 9809826
3 Fleiss PM. The effect of maternal medications on breast-feeding infants. J Hum Lact 1992;8:7 1558663

## Substance Identification

### Substance Name

Lomefloxacin

### CAS Registry Number

98079-51-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Quinolones

Fluoroquinolones